# Hydroxyurea

CASRN: 127-07-1

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, although the evidence for this recommendation for hydroxyurea is very weak.[1,2] A clinical study and a pharmacokinetic model indicate that hydroxyurea is acceptable during breastfeeding. Avoiding breastfeeding during the first 3 hours after a dose can markedly decrease the infant dose. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[3]

### Drug Levels

Maternal Levels. A mother was taking 500 mg of hydroxyurea orally three times a day. Milk samples taken 2 hours after the last dose of each day on 3 days, averaged 6.1 mg/L (range 3.8 to 8.4 mg/L). Using these data, the infant in this case would have received less than 4% of maternal weight-adjusted dosage.[4]

Using a more modern assay, investigators measured hydroxyurea in a mother who was taking an oral dose of 1 gram once daily. Nine milk samples were taken over a 3-day period. Trough milk levels ranged from 0.51 to 1.23 mg/L and the highest level was 19.24 mg/L at 3 hours after the dose on one day. All other measurements fell between these values.[5]

Sixteen lactating mothers, 2 with sickle cell disease, were given 1 gram of hydroxyurea orally. Mothers were a median of 8.6 months (range 2.5 to 22.1 months) postpartum. Milk samples were collected before the dose and at 10 time points over the next 12 hours. A further milk sample obtained at 24 hours after the dose contained no detectable drug (<5 mg/L). Peak plasma levels averaging 12.9 mg/L (range 6.2 to 23 mg/L) occurred at a mean of 2.2 hours (range 0.9 to 3.6 hours) after the dose. Milk levels averaged about 84% of plasma levels and closely paralleled plasma levels. There was no difference between the patients and normal volunteers. The authors calculated that an average of 2.2 mg (0.41 mg/kg) was excreted into breastmilk over 24 hours, but 1.2 mg of this was in the first 3 hours. A pharmacokinetic model created using these data predicted that the daily dosage that an infant would receive would be 0.46 mg/kg daily or 3.4% of the maternal weight-adjusted dosage. By avoiding breastfeeding for 3 hours after the dose, the amount of drug transferred to the infant would be cut in half.[6] Data from this study were used to create a population pharmacokinetic model. The model showed that the RID remained below 10% of the maternal dose across all age cohorts between 0 to 9 months of age.[7]

A physiologically based pharmacokinetic model developed from previously published data indicate that the breastfed infant’s exposure to hydroxyurea was greatest at about one month of age when milk intake is at its highest. Neonatal RID increased from 0.6% at 1 day to 10% at the 4th week postpartum before declining to 5%, 3%, and 2% at 6, 9, and 12 months postpartum, respectively. It also predicted that about 56% of total milk hydroxyurea exposure is within the first 3 hours after a dose.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, . Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 National Institutes of Health. National Heart, Lung and Blood Institute. Evidence-based management of sickle cell disease. Expert panel report. 2014 http://www.nhlbi.nih.gov/sites/www.nhlbi.nih.gov/files/sickle-cell-disease-report.pdf
3 Urbaniak C, McMillan A, Angelini M, . Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
4 Sylvester RK, Lobell M, Teresi ME, . Excretion of hydroxyurea into milk. Cancer 1987;60:2177-8.3481556
5 Marahatta A, Ware RE. Hydroxyurea: Analytical techniques and quantitative analysis. Blood Cells Mol Dis 2017;67:135-42.28847416
6 Ware RE, Marahatta A, Ware JL, . Hydroxyurea exposure in lactation: A pharmacokinetics study (HELPS). J Pediatr 2020;222:236-9.32171562
7 Hosawi A, Irie K, Dong M, . Model-informed evaluation of hydroxyurea exposure during lactation. Clin Pharmacol Ther 2026
8 Abduljalil K, Deferm N, Murphy A, . Physiologically based pharmacokinetic modelling of hydroxyurea in patients with sickle cell disease: A special focus on lactating women and breastfed infants to inform safe dosing and breastfeeding strategies. Pharmaceuticals (Basel) 2026;19:220.41754760

## Substance Identification

### Substance Name

Hydroxyurea

### CAS Registry Number

127-07-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Antisickling Agents

Enzyme Inhibitors

Nucleic Acid Synthesis Inhibitors